# Verteporfin

CASRN: 129497-78-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal verteporfin doses of 6 mg per square meter produce low levels in milk. Withholding breastfeeding for 24 to 48 hours after verteporfin administration should minimize risk to the breastfed infant.

### Drug Levels

Maternal Levels. According to the manufacturer, verteporfin and its diacid metabolite were found in the breastmilk of one woman after a 6 mg per square meter IV infusion. The verteporfin levels in breastmilk were up to 66% of the corresponding plasma levels and became unmeasurable (<2 mcg/L) within 24 hours. The diacid metabolite had lower peak breastmilk concentrations, but persisted up to at least 48 hours.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Verteporfin

### CAS Registry Number

129497-78-5

### Drug Class

- Breast Feeding
- Lactation
- Porphyrins
- Photosensitizing Agents